# Brexpiprazole

CASRN: 913611-97-9

## Drug Levels and Effects

### Summary of Use during Lactation

Preliminary information indicates that brexpiprazole in milk does not adversely affect infant growth and development, but that it might decrease the milk supply. Brexpiprazole has been used successfully to counteract galactorrhea and hyperprolactinemia in a woman taking paliperidone. If a mother requires brexpiprazole, it is not a reason to discontinue breastfeeding, but until more data are available, an alternate drug may be preferred. Monitor the infant for adequate weight gain.

### Drug Levels

Maternal Levels. A woman with schizophrenia received brexpiprazole 2 mg once daily, risperidone 2 mg twice daily and quetiapine 12.5 mg twice daily during pregnancy and postpartum. Concentrations of brexpiprazole in breastmilk were 1 mcg/L on day 4 approximately 2 hours after the last dose, 2.3 mcg/L on day 5 at 6.5 hours after the last dose, and 6 mcg/L on day 6 at 22 hours after the last dose. The authors estimated the relative infant dose to be about 0.7%, although an insufficient amount of sampling was performed to verify this value.[1]

Infant Levels. A breastfed newborn infant whose mother was taking brexpiprazole 2 mg once daily, risperidone 2 mg twice daily and quetiapine 12.5 mg twice daily during pregnancy and postpartum had serum levels measured. At birth, the cord blood level was 3.9 mcg/L from maternal use during pregnancy. The neonate ingested small volumes of colostrum and milk 12 times from 46 to 86.5 hours after birth. Serum levels declined with a half-life of 45.9 hours between 16.5 and 41 hours after birth. By about 115 hours postpartum, brexpiprazole was undetectable (<0.5 mcg/L) in the infant’s serum.[1]

### Effects in Breastfed Infants

Three mothers who took brexpiprazole 1 or 2 mg daily during pregnancy and postpartum delivered infants who partially breastfed. All had mild neonatal jaundice, which was thought to not be related to the drug. All infants were gaining weight and developing normally at one month of age and no adverse drug effects were reported.[2]

A woman with bipolar disorder took brexpiprazole and quetiapine during pregnancy and postpartum. The quetiapine dosage was titrated to 150 mg nightly, and the brexpiprazole dosage was 1 mg daily. The patient exclusively breastfed and her infant was closely monitored through 6 months of age. Growth parameters, physical health, and neurodevelopmental milestones were age appropriate, with no observed adverse effects attributable to medication exposure.[3]

### Effects on Lactation and Breastmilk

A woman was taking brexpiprazole 2 mg daily during the third trimester of pregnancy for bipolar disorder. Her newborn infant was hospitalized in the NICU for hypoxic ischemic encephalopathy for 18 days. While her infant was in the NICU, she reduced her brexpiprazole dose to 2 mg every 2 days because of a shortage of medication. The mother, who had successfully breastfed 2 previous infants, pumped milk 10 times daily and was able to pump 120 mL daily by one week postpartum. After her infant was discharged, she increased the dose back to 2 mg daily. At a follow-up clinic visit, she could only pump 30 mL daily. She then stopped brexpiprazole and began a short course of metoclopramide. Within 10 days of stopping brexpiprazole, her milk supply increased, and she could almost exclusively breastfeed her infant who gained weight normally. Her serum prolactin level also increased to normal.[4]

A review of case reports of adverse reactions reported in the US Food and Drug Administration’s Adverse Event Reporting System from 2015 to 2023 found 6 reports of “lactation disorder” and 10 cases of “breast discharge” reported with brexpiprazole. Other details were lacking.[5]

Three mothers took brexpiprazole 1 or 2 mg daily during pregnancy and postpartum. All of them had to feed both formula and breastmilk, suggesting that the drug might suppress lactation. However, one of the infants was born with a cleft palate that made breastfeeding difficult.[2]

A 26-year-old woman with paranoid schizophrenia was started on paliperidone 12 mg daily. Twenty-six days after treatment initiation a satisfactory plasma paliperidone level of 42 mcg/L was achieved (therapeutic range 20 to 60 mcg/L). The patient developed galactorrhea 4 weeks following paliperidone initiation. Two serial prolactin measurements, weeks 4 and 5 weeks after treatment onset revealed persistent elevation of prolactin above the upper limit of normal, at 130 mcg/L (physiological range 5 to 23 mcg /L). Brexpiprazole 1 mg daily was begun to normalize serum prolactin. Three weeks after the introduction of brexpiprazole, a prolactin assay demonstrated a marked reduction in serum prolactin, from 130 to 37 mcg/L and the galactorrhea resolved. One month later the prolactin level remained at 39 mcg/L. The patient’s periods subsequently returned to a regular pattern also.[6]

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Konishi T, Kitahiro Y, Fujiwara N, et al. Pharmacokinetics of brexpiprazole, quetiapine, risperidone, and its active metabolite paliperidone in a postpartum woman and her baby. Ther Drug Monit 2024;46:687–91.38648649
2 Fukuda A, Oyanagi G, Kikuchi S, et al. Evaluation of the safety of taking brexpiprazole during the lactation period. Breastfeed Med 2026;21:275–9.41649070
3 Alsupiany A. Brexpiprazole and quetiapine use during pregnancy and lactation: A case report. Clin Case Rep 2026;14:e73092.42416040
4 Berlin S, Bodnar K. Low breast milk production associated with brexipiprazole (Rexulti). Breastfeed Med 2020;15:A–3. doi:10.1089/bfm.2020.29162.abstracts
5 Jiang Y, Zhou L, Shen Y, et al. Safety assessment of brexpiprazole: Real-world adverse event analysis from the FAERS database. J Affect Disord 2024;346:223–9.37956832
6 Humbert-Claude M, Barbé T, Ionescu MC, et al. Brexpiprazole mitigates hyperprolactinaemia induced by paliperidone in a patient with a history of skin reaction to aripiprazole: Case report introducing a new therapeutic approach. BJPsych Open 2026;12:e137.42144793

## Substance Identification

### Substance Name

Brexpiprazole

### CAS Registry Number

913611-97-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents

Serotonin Agents

Dopamine Agonists